# Tofacitinib

CASRN: 477600-75-2

## Drug Levels and Effects

### Summary of Use during Lactation

Data from 3 mothers indicate that the amount in milk is low, and no adverse effects were seen in infants who were exclusively breastfed during maternal tofacitinib use. Until more data become available, tofacitinib should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Expert opinion considers breastfeeding to be unadvisable during tofacitinib use at this time.[1-3] The manufacturer and an expert panel recommend that breastfeeding be discontinued during tofacitinib therapy and for 18 hours after the last dose of the immediate-release product or 36 hours after the last dose of the sustained-release product.[4]

### Drug Levels

Maternal Levels. A woman with treatment-refractory ulcerative proctitis was started on tofacitinib 10 mg twice daily. She was nursing her 30-month-old daughter once daily. She stopped breastfeeding when tofacitinib was started, but collected 37 timed milk samples over 14 hours after a dose 25 days after stopping breastfeeding while she was still producing milk. The highest tofacitinib milk concentration of 54.5 mcg/L occurred 4 hours after the dose and the lowest milk concentration of 2 mcg/L occurred 14 hours after the dose. Based on the highest milk concentration, the infant would receive 3.4% of the mother’s weight-adjusted dosage.[5]

One nursing mother taking tofacitinib 5 mg twice daily donated 18 prenursing milk samples on days 20 to 22 postpartum. The median level was 7.8 mcg/L (range 1.8 to 32.8 mcg/L). The highest milk concentration of 32.8 mcg/L occurred 3.5 hours after a maternal dose of tofacitinib. The lowest concentration of 1.8 mcg/L occurred 11.3 hours after the previous tofacitinib dose. Based on the highest milk level, the worst-case daily infant dosage was 4.9 mcg/kg, equating to a weight-adjusted relative infant dose of 3.4%.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two mothers took tofacitinib during pregnancy while breastfeeding exclusively. One infant whose mother was taking a dose of 10 mg twice daily was breastfed for 6 weeks. At 3.5 of age the infant had normal growth and psychomotor development, and no negative safety signals were seen. The infant received the mandatory non-live vaccinations without complications. A second infant, whose mother was taking tofacitinib 5 mg twice daily and vedolizumab 300 mg every 4 weeks for ulcerative colitis postpartum was followed. She breastfed her infant exclusively for the first 6 months postpartum, and continued breastfeeding for at least 16 months. The child demonstrated normal growth and psychomotor development. The infant received 3 doses of a required hexavalent vaccine (tetanus, diphtheria, polio, pertussis, hepatitis B, and Haemophilus influenza type B) as well as optional non-live vaccines (pneumococcal and meningococcal vaccines) on schedule at 3, 5, and 14 months, with no adverse events reported. At 12 months of age, the child contracted chickenpox, which had a mild course. No other infectious complications were noted. A blood sample was collected from the child at 15 months. Laboratory analysis revealed normal levels of immunoglobulin classes, except for a slightly reduced total IgG antibody level and non-significant anemia. The titers of post-vaccination antibodies were within the typical range for a healthy population, indicating a normal response to vaccination. Extended T-cell and B-cell immunophenotyping was normal, except for mild, non-significant deviations in some T-cell and B-cell populations. The neonatal screening for severe combined immunodeficiency (SCID) was negative. No severe or clinically meaningful pathological findings were observed.[6,7]

A woman was taking tofacitinib 10 mg twice daily for ulcerative proctocolitis. She reduced the dose to 5 mg twice daily at week 23 of pregnancy and continued it for the rest of her pregnancy and while breastfeeding (extent not stated). At 12 weeks of age, the infant underwent a thorough immunologic evaluation that was normal. The infant was given two doses of the live rotavirus vaccine (Rotarix, GlaxoSmithKline) at weeks 13 and 20 of age. No adverse events were reported following immunization, including severe vomiting, diarrhea or intussusception, with active and passive surveillance. The infant was healthy at 12 months of age.[8]

A woman was given tofacitinib 10 mg twice daily for treatment of alopecia universalis. She had two pregnancies. After her first pregnancy, she exclusively breastfed her infant and resumed tofacitinib 10 mg twice daily at about 4 weeks postpartum without timing of breastfeeding with respect to doses. The infant was followed for 24 months, and no immediate adverse effects were seen. In her second pregnancy, the dose of tofacitinib was reduced to 5 mg twice daily at 4 months of gestation. She exclusively breastfed her infant with no reported immediate adverse effects.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Tocilizumab

### References

1 Selinger C, Laube R, Limdi JK, et al. Appropriateness of small molecule agents for patients with IBD of childbearing age - a RAND/UCLA appropriateness panel. Therap Adv Gastroenterol 2024;17:17562848241299737.39539488
2 Mahadevan U, Seow CH, Barnes EL, et al. Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1–S60.40874901
3 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
4 Mahadevan U, Robinson C, Bernasko N, et al. Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508–24.30658060
5 Julsgaard M, Mahadevan U, Vestergaard T, et al. Tofacitinib concentrations in plasma and breastmilk of a lactating woman with ulcerative colitis. Lancet Gastroenterol Hepatol 2023;8:695–7.37269871
6 Mitrova K, Julsgaard M, Augustijns P, et al. Tofacitinib in pregnancy: Assessing pregnancy and infant outcomes, cord blood and breast milk concentrations. Clin Gastroenterol Hepatol 2025;23:163–5.e3.38309493
7 Mitrova K, Kostrejova M, Zdychyncova K, et al. Effect of tofacitinib exposure in utero and during breastfeeding on the immune status of exposed child. J Crohns Colitis 2025;19:jjaf049.40127036
8 Ernest-Suarez K, Murguía-Favela LE, Novak KL, et al. Normal infant immunologic assessment and uneventful live rotavirus vaccination despite continuous tofacitinib exposure in utero and during breastfeeding. Crohns Colitis 360 2024;6:otae006.38317692

## Substance Identification

### Substance Name

Tofacitinib

### CAS Registry Number

477600-75-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents

Enzyme Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors

Signal Transduction Inhibitors

Protein Kinase Inhibitors